# Meprobamate

CASRN: 57-53-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with meprobamate during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant, or when other drugs that can cause sedation are used simultaneously. If meprobamate is required by the mother, it is not necessarily a reason to discontinue breastfeeding. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. One author reported a personal communication from the manufacturer. The manufacturer reports that 6 lactating women who were given a single 800 mg oral dose of meprobamate had peak milk meprobamate concentrations 4 hours after the dose.[1]

The muscle relaxant carisoprodol is metabolized to meprobamate. A mother taking carisoprodol 700 mg three times daily during pregnancy and lactation had trough breastmilk levels of carisoprodol and meprobamate measured before the first morning dose on 4 consecutive days at steady-state (time postpartum not stated). Average minimum breastmilk levels were 0.9 mg/L for carisoprodol and 11.6 mg/L for meprobamate. The authors calculated that the minimum infant dose of the drug plus metabolite was 1.9 mg/kg daily or 4.1% of the maternal weight-adjusted dosage. Extrapolating these results to an average (rather than minimum) dose, the authors estimated that an exclusively breastfed infant would receive 3 mg/kg daily or 6% of the maternal weight-adjusted dosage.[2]

A woman who was suspected to have been abusing carisoprodol had the drug and meprobamate detectable in breastmilk for 2 consecutive days after hospitalization; only meprobamate was detectable on day 3.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

One paper reported that some psychiatric patients receiving meprobamate alone or in combination with other psychotropic drugs developed galactorrhea. Further details of meprobamate use were not reported.[4]

### Alternate Drugs to Consider

Lorazepam, Oxazepam

### References

1 Ayd FJ. Excretion of psychotropic drugs in human breast milk. Int Drug Ther Newsl 1973;8:33-40.
2 Nordeng H, Zahlsen K, Spigset O. Transfer of carisoprodol to breast milk. Ther Drug Monit 2001;23:298-300.11360042
3 Bailey DN, Briggs JR. Carisoprodol: An unrecognized drug of abuse. Am J Clin Pathol 2002;117:396-400.11888078
4 Hooper JH, Jr, Welch VC, Shackelford RT. Abnormal lactation associated with tranquilizing drug therapy. JAMA 1961;178:506-7.14448766

## Substance Identification

### Substance Name

Meprobamate

### CAS Registry Number

57-53-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Anxiety Agents

Hypnotics and Sedatives

Muscle Relaxants, Central